# Ferumoxsil

CASRN: 171544-35-7

## Drug Levels and Effects

### Summary of Use during Lactation

Ferumoxsil is not approved for marketing in the United States by the U.S. Food and Drug Administration. No information is available on the clinical use of ferumoxsil during breastfeeding. If ferumoxsil is required by the mother, it is not a reason to discontinue breastfeeding.[1] However, since there is no published experience with ferumoxsil during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1. Cova MA, Stacul F, Quaranta R et al. Radiological contrast media in the breastfeeding woman: a position paper of the Italian Society of Radiology (SIRM), the Italian Society of Paediatrics (SIP), the Italian Society of Neonatology (SIN) and the Task Force on Breastfeeding, Ministry of Health, Italy. Eur Radiol. 2014;24:2012-22.24838733

## Substance Identification

### Substance Name

Ferumoxsil

### CAS Registry Number

171544-35-7

### Drug Class

- Breast Feeding
- Lactation
- Contrast Media
- Diagnostic Agents